# Thioguanine

CASRN: 154-42-7

## Drug Levels and Effects

### Summary of Use during Lactation

Thioguanine nucleosides are active intracellular metabolites of azathioprine and have been measured in breastmilk and in infant serum following maternal use of azathioprine as an immunosuppressant. Thioguanine levels in milk are low after immunosuppressant doses of the drug or of azathioprine. It might be desirable to monitor exclusively breastfed infants with a complete blood count with differential, and liver function tests if thioguanine is used during lactation, although some authors feel that monitoring is unnecessary.[1] Most sources consider the thiopurines acceptable to use in low, immunosuppressant doses.[2-5]

Most sources consider breastfeeding to be contraindicated during maternal antineoplastic drug therapy, although antimetabolites such as thioguanine appear to pose the least risk to breastfed infants.[6] After high-dose thioguanine use in chemotherapy, it might be possible to breastfeed safely during intermittent therapy with an appropriate period of breastfeeding abstinence. Although no data are available to determine an appropriate period to withhold breastfeeding, the drug's terminal half-life suggests that withholding breastfeeding for 4 days may be sufficient. Chemotherapy may adversely affect the normal microbiome and chemical makeup of breastmilk.[7]

### Drug Levels

Maternal Levels. Four women receiving an immunomodulator to treat inflammatory bowel disease had metabolite levels measured in milk during the first 6 weeks postpartum. The abstract does not mention the specific drug and dose being taken, but the azathioprine metabolite 6-thioguanine nucleosides (6-TGNs) were measured. Although therapeutic levels were found in maternal serum, 6-TGNs was undetectable (<123 mcg/L) in milk (time of collection not stated).[8]

One woman received thioguanine for inflammatory bowel disease during pregnancy and lactation. She was receiving thioguanine 0.7 mg/kg daily in divided doses to treat colitis. Her breastmilk level at delivery was 48 nanomoles/L (8.03 mcg/L).[9]

Infant Levels. Four infants were breastfed (3 exclusively, 1 rarely received formula) during maternal use of azathioprine orally in dosages of 1.2 to 2.1 mg/kg daily. All of the mothers and infants had the wild type TPMT *1/*1 genotype and all of the mothers had normal enzyme activity. At 3 to 3.5 months of age, all of the infants had undetectable blood levels of 6-TGNs.[10]

Three infants whose mothers were taking azathioprine for inflammatory bowel disease (n = 2) or systemic lupus erythematosus (n = 1) were breastfed during maternal use of azathioprine. Azathioprine doses were 100 mg (plus prednisolone), 150 mg (plus infliximab) and 175 mg daily. In 1 infant, thioguanine was low, but detectable in blood at 3 days of age; at 3 weeks of age, thioguanine was not detectable. In another infant, thioguanine was undetectable at 3 weeks of age. Neither assay limits nor specific maternal doses were stated in the published abstract.[11]

A woman began taking azathioprine 100 mg (1.4 mg/kg) daily for Crohn's disease while breastfeeding (extent not stated) her 3-month-old infant. After 8 days and 3 months of maternal therapy, 6-TGNs were measured, although breastfeeding had been tapered to zero by 3 months. On both occasions, 6-TGNs were not detectable in the blood of the infant. The assay limit was not stated.[1]

### Effects in Breastfed Infants

Thioguanine is an active metabolite of azathioprine. Numerous infants breastfed during maternal azathioprine in dosages up to 250 mg daily have been reported with no adverse effects noted. See the Azathioprine record for details.

Ninety-nine women, mostly with Crohn’s disease, who were taking thioguanine were followed during pregnancy and postpartum. In 98 pregnancies, thioguanine was continued during breastfeeding (extent not stated) in 38% of infants. No reported complications were reported in the 37 breastfed infants.[3]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Christensen LA, Dahlerup JF, Nielsen MJ, et al. Azathioprine treatment during lactation: Authors' reply. Aliment Pharmacol Ther 2009;30:91. doi:.10.1111/j.1365-2036.2009.03996.x
2 Sammaritano LR, Bermas BL, Chakravarty EE, et al. 2020 American College of Rheumatology Guideline for the Management of Reproductive Health in Rheumatic and Musculoskeletal Diseases. Arthritis Rheumatol 2020;72:529-56.32090480
3 Crouwel F, Simsek M, de Boer MA, et al. Exposure to thioguanine during 117 pregnancies in women with inflammatory bowel disease. J Crohns Colitis 2023;17:738-45.36521000
4 Torres J, Chaparro M, Julsgaard M, et al. European Crohn's and Colitis Guidelines on Sexuality, Fertility, Pregnancy, and Lactation. J Crohns Colitis 2023;17:1-27.36005814
5 Laube R, Selinger CP, Seow CH, et al. Australian inflammatory bowel disease consensus statements for preconception, pregnancy and breast feeding. Gut 2023;72:1040-53.36944479
6 Pistilli B, Bellettini G, Giovannetti E, et al. Chemotherapy, targeted agents, antiemetics and growth-factors in human milk: How should we counsel cancer patients about breastfeeding? Cancer Treat Rev 2013;39:207-11. doi:10.1016/j.ctrv.2012.10.002 23199900
7 Urbaniak C, McMillan A, Angelini M, et al. Effect of chemotherapy on the microbiota and metabolome of human milk, a case report. Microbiome 2014;2:24.25061513
8 Kane SV, Present DH. Metabolites to immunomodulators are not detected in breast milk. Am J Gastroenterol 2004;99 (10 Suppl. S):S246-7. doi:10.1111/j.1572-0241.2004.001_1.x
9 Pavlidis P, Ansari A, Duley J, et al. Splitting a therapeutic dose of thioguanine may avoid liver toxicity and be an efficacious treatment for severe inflammatory bowel disease: A 2-center observational cohort study. Inflamm Bowel Dis 2014;20:2239-46.25230165
10 Gardiner SJ, Gearry RB, Roberts RL, et al. Exposure to thiopurine drugs through breast milk is low based on metabolite concentrations in mother-infant pairs. Br J Clin Pharmacol 2006;62:453-6.16995866
11 Bernard N, Garayt C, Chol F, et al. Prospective clinical and biological follow-up of three breastfed babies from azathioprine-treated mothers. Fundam Clin Pharmacol 2007;21 (Suppl. 1):62-3. doi:10.1111/j.1472-8206.2007.00481.x

## Substance Identification

### Substance Name

Thioguanine

### CAS Registry Number

154-42-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antimetabolites

Antineoplastic Agents